# Cefuroxime

CASRN: 55268-75-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that cefuroxime produces low levels in milk that are not expected to cause severe adverse effects in breastfed infants. Cefuroxime does not appear to alter the flora of breastmilk when used alone, but it can alter the infant’s fecal flora.[1] Occasionally, diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefuroxime is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. A single intravenous dose of 750 mg of cefuroxime was given to 5 women. The average peak cefuroxime level in milk was 0.37 mg/L 3 hours after the dose. Individual peak levels of 0.33 to 0.5 mg/L occurred 2 to 4 hours after the dose.[2]

A single intramuscular injection of 750 mg of cefuroxime was given to 8 women with endometritis. Milk cefuroxime levels increased from 0.34 mg/L at 30 minutes after the injection to 1.45 mg/L at 8 hours after the injection.[3]

After cefuroxime 750 mg three times daily intramuscularly, peak milk levels averaging 1.2 mg/L occurred 6 hours after the dose. Cefuroxime was detectable at a concentration of 0.36 mg/L 30 minutes after the dose, and by 8 hours the milk level had decreased to 1.06 mg/L.[4]

One mother received cefuroxime axetil 500 mg orally three times daily for acute mastitis of the left breast following incision and drainage of the lesion. Milk samples were taken from each breast 30 minutes after the dose on day 1 of therapy. The concentration of cefuroxime in the unaffected breast was 90 mcg/L and the concentration in the breast treated for mastitis was 590 mcg/L. On day 2 of therapy, milk samples from the right and left breast were taken 90 minutes after the dose were 57 and 59 mcg/L, respectively. On day 3, milk samples obtained 90 minutes after the dose contained 27 mcg/L in the unaffected breast and 1.07 mg/L in the affected breast.[5]

Two women were who had been receiving intravenous cefuroxime 750 mg 3 times daily for 2 days following cesarean section donated milk samples 1 hours after the dose. Milk concentrations were 0.34 and 0.39 mg/L.[6]

Two women who had just stopped breastfeeding each took a single 500 mg dose or oral cefuroxime axetil. Ten milk samples collected over 24 hours found peak milk concentrations of 618.9 and 685.3 mcg/L at 4 hours after the dose. At 24 hours after the dose, the milk concentration were 28.6 and 26.4 mcg/L.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A prospective, controlled study asked mothers who called an information service about adverse reactions experience by their breastfed infants. Mothers were taking either cephalexin or cefuroxime. No statistical difference was found in the rate of adverse reactions in the 2 groups, with 1 case of diarrhea in each. This amounted to 2.6% of the cefuroxime-exposed infants.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ji C, Zhang G, Xu S, et al. Antibiotic treatments to mothers during the perinatal period leaving hidden trouble on infants. Eur J Pediatr 2022;181:3459-71.35680662
2 Takase Z, Shirofuji H, Uchida M. Fundamental and clinical studies of cefuroxime in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1979;27 (Suppl 6):600-2.
3 Voropaeva SD, Emelyanova AI, Ankirskaya AS, et al. [Effectiveness of using cefuroxime in the obstetrics and gynecology clinic]. Antibiotiki 1982;27:697-701.7149693
4 Amiraslanova LA, Emel'yanova AI, Fursova SA, Rukhadze TG. [Some aspects of ampicillin, kanamycin and cefuroxim pharmacokinetics in puerperant patients with endometritis]. Akush Ginekol (Mosk) 1985;10 14-7.2934996
5 Nakamura T, Hashimoto I, Sawada Y, Mikami J. [Clinical studies on cefuroxime axetil in acute mastitis]. Jpn J Antibiot 1987;40:340-8.3599383
6 Kiriazopoulos E, Zaharaki S, Vonaparti A, et al. Quantification of three beta-lactam antibiotics in breast milk and human plasma by hydrophilic interaction liquid chromatography/positive-ion electrospray ionization mass spectrometry. Drug Test Anal 2017;9:1062-72.27714984
7 Kul A, Sagirli O. Determination of cefuroxime in breast milk by LC-MS/MS using SALLME technique. Biomed Chromatogr 2023:e5744.37698043
8 Benyamini L, Merlob P, Stahl B, et al. The safety of amoxicillin/clavulanic acid and cefuroxime during lactation. Ther Drug Monit 2005;27:499-502.16044108

## Substance Identification

### Substance Name

Cefuroxime

### CAS Registry Number

55268-75-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins